# Ergotamine

CASRN: 113-15-5

## Drug Levels and Effects

### Summary of Use during Lactation

There is limited published experience with ergotamine during breastfeeding and it might cause adverse effects in the infant and decrease milk supply. Most authorities consider ergotamine to be contraindicated during nursing.[1-5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study in which ergotamine was administered to mothers of newborns immediately postpartum in a dose of 1 mg 3 times daily for 6 days found no effect on weight gain in the breastfed infants.[6] Milk intake, and therefore infant dosage, might have been minimal during the first few days before the mothers' milk came in fully.

### Effects on Lactation and Breastmilk

Thirty women who delivered fullterm infants received a single intramuscular dose of methylergonovine 0.2 mg after delivery, followed by oral ergotamine 1 mg 3 times daily for 6 days. Compared to 28 women who delivered fullterm infants and received no ergot derivatives, there was no difference in the milk production, as measured by weight differences before and after nursing, between the 2 groups during the first 6 days postpartum.[6]

A woman who was given ergotamine postpartum for lochia retention experienced severe nipple pain consistent with vasospasm of the nipple or Raynaud syndrome. She was unable to nurse her infant directly, but pumped and fed expressed milk by bottle. The drug had no apparent adverse effect on the milk supply or the infant.[7]

### Alternate Drugs to Consider

Eletriptan, Rizatriptan, Sumatriptan, Zolmitriptan

### References

1 Moretti ME, Lee A, Ito S. (2000). Which drugs are contraindicated during breastfeeding?. Can Fam Physician.
2 WHO Department of Child and Adolescent Health and Development. Breastfeeding and maternal medication. Recommendations for drugs in the eleventh WHO model list of essential drugs. 2002.
3 Davanzo R, Bua J, Paloni G, et al. (2014). Breastfeeding and migraine drugs. Eur J Clin Pharmacol.
4 MacGregor EA. (2014). Migraine in pregnancy and lactation. Neurol Sci.
5 Anderson PO. (2019). Migraine drug therapy during breastfeeding. Breastfeed Med.
6 Jolivet A, Robyn C, Huraux-Rendu C, et al. (1978). J Gynecol Obstet Biol Reprod (Paris).
7 Morze K. (2023). Finding a path in a maze. identification of an adverse reaction during lactation based on a case study of ergotamine. Breastfeed Med.

## Substance Identification

### Substance Name

Ergotamine

### CAS Registry Number

113-15-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Alpha-Agonists

Analgesics, Non-Narcotic

Ergot Alkaloids

Vasoconstrictor Agents